# Edotreotide Gallium Ga-68

CASRN: 2101630-92-4

## Drug Levels and Effects

### Summary of Use during Lactation

Edotreotide gallium Ga-68 (Ga 68 Dotatoc) is used for localization of somatostatin receptor positive neuroendocrine tumors. Labeling in the U.S. advises nursing mothers to pump and discard breastmilk for 8 hours after a dose.

Mothers concerned about the level of radioactivity in their milk could ask to have it tested at a nuclear medicine facility at their hospital. When the radioactivity is at a safe level, she may resume breastfeeding. A method for measuring milk radioactivity and determining the time when a mother can safely resume breastfeeding has been published.[1]

Nursing mothers should not work with radioactive substances used in PET scans in their workplace.[2]

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### References

1 Stabin MG, Breitz HB. Breast milk excretion of radiopharmaceuticals: Mechanisms, findings, and radiation dosimetry. J Nucl Med 2000;41:863-73.10809203
2 Almén A, Mattsson S. Radiological protection of foetuses and breast-fed children of occupationally exposed women in nuclear medicine - Challenges for hospitals. Phys Med 2017;43:172-7.28882410

## Substance Identification

### Substance Name

Edotreotide Gallium Ga-68

### CAS Registry Number

2101630-92-4

### Drug Class

Breast Feeding

Lactation

Milk, Human

Radiopharmaceuticals

Diagnostic Agents

Gallium Radioisotopes